# Migalastat

CASRN: 108147-54-2

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of migalastat during breastfeeding. Because no information is available on the use of migalastat during breastfeeding caution should be used, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Migalastat

### CAS Registry Number

108147-54-2

### Drug Class

- Breast Feeding
- Lactation
- Alpha-Galactosidase
- Enzyme Inhibitors